# Acyclovir

CASRN: 59277-89-3

## Drug Levels and Effects

### Summary of Use during Lactation

Even with the highest maternal dosages, the dosage of acyclovir in milk is only about 1% of a typical infant dosage and would not be expected to cause any adverse effects in breastfed infants.[1] Acyclovir is considered a treatment of choice for Herpes infections during breastfeeding.[2] Topical acyclovir applied to small areas of the mother's body away from the breast should pose no risk to the infant. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[3]

### Drug Levels

Maternal Levels. A 4-month-postpartum woman was taking 200 mg of acyclovir orally 5 times daily every 4 hours while awake. After 4 days of therapy, milk samples were taken 9 hours after the previous dose and at 4 times after a 200 mg dose. The lowest milk level of 427 mcg/L occurred 30 minutes after the first dose. At 3.2 hours after the dose, the milk acyclovir level was 1.3 mg/L and apparently still increasing.[4]

A woman who was 1 year postpartum was taking acyclovir 200 mg orally 5 times daily. Milk levels taken immediately before a dose during 5 days of therapy ranged from 0.78 to 1.07 mg/L. Acyclovir in milk samples taken after the last dose decreased with a half-life of 2.8 hours.[5]

A woman who had taken oral acyclovir 400 mg 3 times daily for 3 days in the peripartum period had a breastmilk acyclovir level of 54 mcg/L at 5 days after her last dose of acyclovir.[6]

A mother nursing her 7-month-old infant took acyclovir 800 mg orally 5 times a day. Three milk acyclovir levels on days 5 and 6 of therapy ranged from 4.2 to 5.8 mg/L, with the highest level 9.4 hours after the previous dose. The authors estimated that a fully breastfed infant would receive a daily dosage of 0.73 mg/kg of acyclovir at this maternal dosage or about 1% of the maternal weight-adjusted dosage.[7]

A woman who was 6 weeks postpartum received intravenous acyclovir 300 mg (5 mg/kg) three times daily for 5 days. Milk samples were taken every 6 hours after the last dose. The peak level was 7.3 mg/L and the drug was detectable in milk for up to 88 hours after the last dose.[8] Using the level 6 hours after the last dose, a fully breastfed infant would receive a daily dosage of 1.1 mg/kg with this maternal dosage regimen.

Infant Levels. A 4-month-old infant whose mother was taking 200 mg orally 5 times daily was breastfed just before a dose. The infant's urine collected over the next 2 hours contained a total of 27 mcg of acyclovir.[4]

### Effects in Breastfed Infants

The mother of a 4-month-old infant noticed no adverse effects in her breastfed infant while she was taking an acyclovir dosage of 800 mg orally 5 times daily.[7]

A mother with necrotizing herpes simplex keratitis was treated with 3% acyclovir ointment to the affected eye as well as acyclovir 500 mg orally, both 5 times a day. She continued oral acyclovir for 1 year and breastfed during treatment. At the 3 months follow-up, the baby was clinically healthy.[9]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Valacyclovir

### References

1 Kallia V, Schinas G, Karagiannopoulos G, et al. Efficacy and safety of antivirals in lactating women with herpesviridae infections: A systematic review. Viruses 2025;17:538.40284981
2 Clarke E, Patel R, Dickins D, et al. Joint British Association for Sexual Health and HIV and Royal College of Obstetricians and Gynaecologists national UK guideline for the management of herpes simplex virus (HSV) in pregnancy and the neonate (2024 update). Int J STD AIDS 2025;36:4–23.39348176
3 Noti A, Grob K, Biedermann M, et al. Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317–25.14623482
4 Lau RJ, Emery MG, Galinsky RE. Unexpected accumulation of acyclovir in breast milk with estimation of infant exposure. Obstet Gynecol 1987;69 (3 pt 2):468–71.3808527
5 Meyer LJ, de Miranda P, Sheth N, et al. Acyclovir in human breast milk. Am J Obstet Gynecol 1988;158:586–8.3348321
6 Frenkel LM, Brown ZA, Bryson YJ, et al. Pharmacokinetics of acyclovir in the term human pregnancy and neonate. Am J Obstet Gynecol 1991;164:569–76.1847004
7 Taddio A, Klein J, Koren G. Acyclovir excretion in human breast milk. Ann Pharmacother 1994;28:585–7.8068994
8 Bork K, Benes P. Concentration and kinetic studies of intravenous acyclovir in serum and breast milk of a patient with eczema herpeticum. J Am Acad Dermatol 1995;32:1053–5.7751454
9 Agarwal R., Maharana P. K., Titiyal J. S., et al. Bilateral herpes simplex keratitis: Lactation a trigger for recurrence! BMJ Case Rep 2019;12:e223713.30852508

## Substance Identification

### Substance Name

Acyclovir

### CAS Registry Number

59277-89-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents